# Lemon Balm

## Drug Levels and Effects

### Summary of Use during Lactation

Lemon balm (Melissa officinalis) contains a lemon-scented essential oil containing citronellal, neral, and geranial monoterpenoid aldehydes; polyphenolic compounds (including rosmarinic acid); and monoterpene glycosides. Lemon balm is a purported galactogogue, with some weak supporting evidence of galactogogue activity. No data exist on the excretion of any components of lemon balm into breastmilk or on the safety and efficacy of lemon balm alone in nursing mothers or infants. Some evidence of galactogogue activity of barley malt and lemon balm in mothers of preterm infants.[9,10] Lemon balm has been safely and effectively used with other herbs in infants for the treatment of colic, diarrhea, and other conditions,[1,2] so the smaller amounts expected (but not demonstrated) in breastmilk are likely not to be harmful with usual maternal doses. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[3,4] Lemon balm is "generally recognized as safe" (GRAS) as a food flavoring by the U.S. Food and Drug Administration. As a drug, it is generally well tolerated in adults with nausea, vomiting, abdominal pain, dizziness, and wheezing reported occasionally.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A randomized trial assigned mothers of preterm infants to receive either a purported herbal galactogogue tea twice daily, a fruit tea twice daily or nothing. The galactogogue tea mixture (Natal, Hipp [Türkiye]) contained 1% stinging nettle as well as Melissa, caraway, anise, fennel, goat's rue, and lemon grass in unspecified amounts. All mothers received similar breastfeeding advice from the same nurse and two groups were told that the tea would increase milk production, but compliance with the study teas was not assessed. Mother used breast pumps to extract and measure their milk and output on day 1 and day 7 of the study were compared. Although the increase in volume of extracted milk was greater in the galactogogue tea group, there was no difference in maternal serum prolactin between the groups at 7 days. No difference in infant weight gain was seen between groups, although the authors stated that additional supplementation was provided to all infants in addition to the pumped milk.[5] The study was not blinded, the randomization method was not stated, intent-to-treat analysis was not performed, and some of the numerical results were internally inconsistent, so the quality of the study was poor.

A double-blind study compared a commercial galactogogue product (Femaltiker, Nutropharma Llc., Poland) containing barley malt, 70% barley glucan and powdered lemon balm (Melissa officinalis) leaves to an identical placebo in the mothers of preterm infants. Mothers took one packet twice a day for 2 weeks, starting within 3 days of delivery. Milk volume was measured by mothers after extraction using an electric breast pump. Forty mothers in each group completed the study. On day 14 of the study the mothers in the barley group produced more milk than the mothers taking placebo (average 62.5 mL vs 95 mL). The total milk volume over the 2-week period was also greater in the active group compared to the placebo group (average 6036 mL vs 4209 mL).[6] The study had a rather high dropout rate and the results were not subjected to intention-to-treat analysis.

A meta-analysis of randomized, controlled studies in the mothers of preterm neonates examined the efficacy of various herbal galactogogues in increasing milk supply. The authors concluded that a commercial product of barley malt with lemon balm (Femaltiker®) provided a significant increase in milk volume on day 4 postpartum, but low certainty evidence that it increases milk volume at day 7 and very low certainty evidence that the product increases milk volume throughout the 14-day intervention period.[7]

### References

1 Weizman Z, Alkrinawi S, Goldfarb D, et al. Efficacy of herbal tea preparation in infantile colic. J Pediatr 1993;122:650–2.8463920
2 Savino F, Cresi F, Castagno E, et al. A randomized double-blind placebo-controlled trial of a standardized extract of Matricariae recutita, Foeniculum vulgare and Melissa officinalis (ColiMil) in the treatment of breastfed colicky infants. Phytother Res 2005;19:335–40.16041731
3 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
4 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
5 Özalkaya E, Aslandogdu Z, Ozkoral A, et al. Effect of a galactagogue herbal tea on breast milk production and prolactin secretion by mothers of preterm babies. Niger J Clin Pract 2018;21:38–42.29411721
6 Wesolowska A, Pietrzak B, Kociszewska-Najman B, et al. Barley malt-based composition as a galactagogue - a randomized, controlled trial in preterm mothers. Ginekol Pol 2021;92:118–25.33751522
7 Cragg A, Levene I, Darabi S, et al. Herbal galactagogues to improve breastmilk production and lactation in mothers of preterm babies: A systematic review of clinical trials. Eur J Clin Nutr 2026;80:146–58.41350450

## Substance Identification

### Substance Name

Lemon Balm

### Scientific Name

Melissa officinalis

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal